# Nalmefene

CASRN: 55096-26-9

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of nalmefene in nursing mothers. If nalmefene is required by the mother for an opiate overdose, she should withhold nursing until the opiate is out of her system. Because nalmefene has some oral bioavailability, use in a nursing mother might cause abstinence symptoms in a breastfed infant who is opioid tolerant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Nalmefene increases serum prolactin in nonpregnant and nonlactating individuals.[1,2] The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### Alternate Drugs to Consider

Naloxone

### References

1 Kreek MJ, Schluger J, Borg L, et al. Dynorphin A1-13 causes elevation of serum levels of prolactin through an opioid receptor mechanism in humans: Gender differences and implications for modulation of dopaminergic tone in the treatment of addictions. J Pharmacol Exp Ther 1999;288:260-9.9862779
2 Bart G, Schluger JH, Borg L, et al. Nalmefene induced elevation in serum prolactin in normal human volunteers: Partial kappa opioid agonist activity? Neuropsychopharmacology 2005;30:2254-62.15988468

## Substance Identification

### Substance Name

Nalmefene

### CAS Registry Number

55096-26-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Narcotic Antagonists